# Cranberry

CASRN: 91770-88-6

## Drug Levels and Effects

### Summary of Use during Lactation

Cranberry (Vaccinium macrocarpon) fruit contains phenolics, flavonoids, anthocyanidins, and ellagitannins. Some products are standardized based on quinic acid and others are standardized based on phenolics. Cranberry is most often used for prevention of urinary tract infections. It has no specific lactation-related uses. Cranberries appear to increase the milk content of polyphenols and total antioxidant capacity. Cranberry preparations are well tolerated as a food, although stomach discomfort and diarrhea can occur with large doses. Cranberry should be avoided in patients allergic to cranberries, blueberries and other Vaccinium species. Some cases of elevated INR have been reported in patients taking cranberry and warfarin.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Thirty nursing women, 15 with mastitis and 15 without mastitis, were administered cranberries 20 grams daily for 21 days. Another 30 women, 15 with mastitis and 15 without mastitis, did not receive cranberries and served as a control group. Two samples of mature milk were obtained from each mother, one at the beginning of the study and another at the end. Total antioxidant activity was higher at the beginning of the study in milk from the women with mastitis group compared to those without mastitis. With antibiotic treatment, the total antioxidant capacity was similar to control women at the end of the study. In both the control and mastitis groups, the women who receive cranberry supplementation had higher total antioxidant capacity than those who did not. Cranberry supplementation also increased total polyphenol levels in milk both in women with and without mastitis, although the difference from baseline was only statistically significant for those with mastitis. Cranberry supplementation had no effect on milk levels of glutathione or glutathione peroxide.[1]

### References

1 Valls-Bellés V, Abad C, Hernández-Aguilar MT, et al. (2022). Human milk antioxidative modifications in mastitis: Further beneficial effects of cranberry supplementation. Antioxidants.

## Substance Identification

### Substance Name

Cranberry

### Scientific Name

Vaccinium macrocarpon

### CAS Registry Number

91770-88-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal